# Polidocanol

CASRN: 3055-99-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of polidocanol during breastfeeding. Although polidocanol is unlikely to adversely affect the breastfed infant, international guidelines recommend that breastfeeding be withheld for 2 days after sclerotherapy.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Wong M, Parsi K, Myers K, et al. (2023). Sclerotherapy of lower limb veins: Indications, contraindications and treatment strategies to prevent complications - A consensus document of the International Union of Phlebology-2023. Phlebology.

## Substance Identification

### Substance Name

### CAS Registry Number

3055-99-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Detergents

Sclerosing Solutions

Sclerotherapies

Surface-Active Agents